# Cyclobenzaprine

CASRN: 303-53-7

## Drug Levels and Effects

### Summary of Use during Lactation

Amounts of cyclobenzaprine in milk appear to be very small and two infants apparently tolerated the drug in milk well. If the mother requires cyclobenzaprine, it is not a reason to discontinue breastfeeding. Monitor the infant for (drowsiness, adequate weight gain, and developmental milestones), especially in neonates and preterm infants and when using combinations of sedating drugs.

### Drug Levels

Maternal Levels. Two mothers were taking chronic cyclobenzaprine therapy. One mother was taking 5 mg once daily for temporomandibular joint pain and the other mother was taking 10 mg twice daily for fibromyalgia pain. Each collected milk at 0, 1, 2, 4, 6, 8 and 12 hours after a dose. After the 5 mg dose, the peak milk level was 6.6 mcg/L, and the average level was 2.2 mcg/L. After the 10 mg dose, the peak milk level was 24.5 mcg/L, and the average level was 10.3 mcg/L. These amounts resulted in the respective infant dosages of 0.3 mcg/kg and 0.7 mcg/kg daily. In both cases, the weight-adjusted dosage was 0.5% of the maternal dosage.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Two mothers were taking chronic cyclobenzaprine therapy. One mother was taking 5 mg once daily for temporomandibular joint pain and the other mother was taking 10 mg twice daily for fibromyalgia pain. The latter mother was also taking unspecified antidepressants, levothyroxine, zolpidem, alprazolam and famotidine. Both mothers were breastfeeding their infants (extent not stated). Neither infant had any noticeable adverse reaction such as sedation.[1]

A search was performed of the shared database of all U.S. poison control centers for the time period of 2001 to 2017 for calls regarding medications and breastfeeding. Of 2319 calls in which an infant was exposed to a substance via breastmilk, 1 of 7 classified as resulting in a major adverse effect involved cyclobenzaprine. A 16-day-old infant was exposed to cyclobenzaprine, acetaminophen and oxycodone in breastmilk. The infant was admitted to the hospital in a noncritical care unit for bradycardia, hypotension, and respiratory arrest. The dosages and extent of breastfeeding were not reported and the infant survived.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Carisoprodol

### References

1 Burra B, Datta P, Rewers-Felkins K, et al. Transfer of cyclobenzaprine into human milk and subsequent infant exposure. J Hum Lact 2019;35:559-62.31017819
2 Beauchamp GA, Hendrickson RG, Horowitz BZ, et al. Exposures through breast milk: An analysis of exposure and information calls to U.S. poison centers, 2001-2017. Breastfeed Med 2019;14:508-12.31211594

## Substance Identification

### Substance Name

Cyclobenzaprine

### CAS Registry Number

303-53-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Muscle Relaxants, Central